# Pyrethrins

CASRN: 8003-34-7

## Drug Levels and Effects

### Summary of Use during Lactation

Because absorption after topical application is very limited, occasional pyrethrins and piperonyl butoxide use is acceptable in nursing mothers. Extensive exposure, such as from agricultural use or malaria control might have long-term health concerns because residues can be found in breastmilk.[1] Only water-miscible cream, gel or liquid products should be applied to the breast because ointments may expose the infant to high levels of mineral paraffins via licking.[2]

### Drug Levels

Maternal Levels. Pyrethrins were measured in 53 breastmilk samples from 29 mothers collected 1998 to 1999 in Basel Switzerland. Pyrethrins were detected in 42 milk samples, even in mothers from households that reported no pyrethrin use. The average pyrethrins concentration was 89 mcg/kg of fat (range undetectable [<25 mcg/kg] to 341 mcg/kg fat).[3]

Pyrethroids (permethrin, cyfluthrin, cypermethrin and deltamethrin) were found in the breastmilk of nursing mothers in 3 South African towns. Average levels in breastmilk ranged from 8.3 to 48.4 mcg/L in the 3 towns. The source was thought to be from a dusting powder widely available and used in gardening. The dosage and route of exposure (i.e., topical, inhalation, oral) could not be determined. All milk levels were below the allowable daily limit for permethrin.[4,5]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Ivermectin, Permethrin

### References

1 Bouwman H, Kylin H. Malaria control insecticide residues in breast milk: the need to consider infant health risks. Environ Health Perspect 2009;117:1477-80.20019894
2 Noti A, Grob K, Biedermann M, et al. Exposure of babies to C(15)-C(45) mineral paraffins from human milk and breast salves. Regul Toxicol Pharmacol 2003;38:317-25.14623482
3 Zehringer M, Herrmann A. Analysis of polychlorinated biphenyls, pyrethroid insecticides and fragrances in human milk using a laminar cup liner in the GC injector. Eur Food Res Technol 2001;212:247-51. doi:10.1007/s002170000223
4 Sereda B, Bouwman H, Kylin H. Comparing water, bovine milk, and indoor residual spraying as possible sources of DDT and pyrethroid residues in breast milk. J Toxicol Environ Health A 2009;72:842-51.19557612
5 Bouwman H, Sereda B, Meinhardt HM. Simultaneous presence of DDT and pyrethroid residues in human breast milk from a malaria endemic area in South Africa. Environ Pollut 2006;144:902-17.16564119

## Substance Identification

### Substance Name

Pyrethrins

### CAS Registry Number

8003-34-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiparasitic Agents

Insecticides